# Gepirone

CASRN: 83928-76-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of gepirone during breastfeeding. The drug has poor oral bioavailability, so the infant is unlikely to absorb large amounts. Monitor breastfed infants for adverse reactions, such as irritability, restlessness, excessive somnolence, decreased feeding, and weight loss. An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

## Substance Identification

### Substance Name

Gepirone

### CAS Registry Number

83928-76-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Anti-Anxiety Agents

Serotonin Receptor Agonists